# Methohexital

CASRN: 18652-93-2

## Drug Levels and Effects

### Summary of Use during Lactation

Amounts of methohexital in milk are very small. Existing data indicate that no waiting period is required before resuming breastfeeding after a single dose of methohexital. Breastfeeding can be resumed as soon as the mother has recovered sufficiently to nurse. When a combination of anesthetic agents is used for a procedure, follow the recommendations for the most problematic medication used during the procedure.

### Drug Levels

Maternal Levels. Nine women who were at least 1 month postpartum received between 120 and 150 mg of methohexital intravenously for induction of general anesthesia for bilateral tubal ligation. Milk samples were obtained in the recovery room after surgery, the evening of surgery and on the day after surgery. The highest milk level was found at 63 minutes after the dose in one woman. Milk levels 1 to 2 hours after the dose ranged from 100 to 407 mcg/L (n = 5); levels 2 to 4 hours after the dose ranged from 39 to 199 mcg/L (n = 4); levels 8 to 10 hours after the dose ranged from undetectable (<20 mcg/L) to 65 mcg/L (n = 9). Methohexital was not detectable in the breastmilk of any woman 24 to 48 hours after the dose. The authors estimated that the typical breastfed infant would receive a maximum single dose of 0.04 mg of methohexital in a 100 mL feeding 1 hour after the dose or between 0.1 to 0.8% of the maternal weight-adjusted dosage.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Dexmedetomidine, Etomidate, Propofol, Thiopental

### References

1 Borgatta L, Jenny RW, Gruss L, et al. (1997). Clinical significance of methohexital, meperidine, and diazepam in breast milk. J Clin Pharmacol.

## Substance Identification

### Substance Name

Methohexital

### CAS Registry Number

18652-93-2

### Drug Class

Breast Feeding

Lactation

Anesthetics, Intravenous